# Valganciclovir

CASRN: 175865-60-8

## Drug Levels and Effects

### Summary of Use during Lactation

Valganciclovir is rapidly converted to ganciclovir. Several factors might affect the decision to use valganciclovir in a nursing mother. No information is available on the clinical use of ganciclovir or valganciclovir during breastfeeding. Cytomegalovirus (CMV) can be transmitted to infants though breastmilk, with preterm and immunocompromised infants at greatest risk. No information is available on any changes in the risk of transmission if the mother is being treated with ganciclovir or valganciclovir. Although the manufacturer recommends avoiding breastfeeding during valganciclovir use because of the risk of infant drug toxicity, neonates with CMV infections are often treated directly with ganciclovir or valganciclovir. If the mother has a concurrent infection with HIV, breastfeeding is not recommended in the United States and other developed countries.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Valganciclovir

### CAS Registry Number

175865-60-8

### Drug Class

Breast Feeding

Lactation

Anti-Infective Agents

Antiviral Agents